# Ocrelizumab

CASRN: 637334-45-3

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of ocrelizumab in milk are low and undetectable in the serum of breastfed infants. Many infants have been exposed to ocrelizumab during breastfeeding. No excess of infections or reductions of B-cells have been reported. Infant growth has been normal, and no evidence of severe or persistent harm has been reported. Most expert guidelines consider breastfeeding with ocrelizumab to be acceptable.[1-3] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[4]

### Drug Levels

Maternal Levels. An international, multicenter study of patients with multiple sclerosis or neuromyelitis optica spectrum disorder collected breastmilk samples from 33 women who were receiving ocrelizumab. Milk samples were collected at a mean of 2.6 months (range 0.1 to 36) postpartum. The women received 300 mg once (n = 4) or twice (n = 10) or 600 mg (n = 16) and milk samples were collected before and up to 90 days after the dose. Where measurable (n = 16 samples), the peak concentration in milk usually occurred between 1 and 7 days after the dose. Milk concentrations were virtually undetectable at 90 days after a dose. For 4 women who received a single 300 mg dose, the average milk concentration was 0.08 mg/L, and the peak was 0.4 mg/L. For 10 women who receive a single 600 mg dose, the average milk concentration was 0.1 mg/L, and the peak was 0.3 mg/L. For 16 women who received two 300 mg doses, the average milk concentration was 0.08 mg/L and the peak was 0.2 mg/L. Based on the average milk levels, infants would receive a dose of 0.01 mg/kg daily.[5]

Thirteen women with MS receiving ocrelizumab and their infants were enrolled at a median infant age of 2 months (range 0.5 to 5 months) at the time of drug infusion. The ocrelizumab levels in breastmilk resulted in a median average daily infant dosage of 45.1 mcg and a median RID of 0.27%.[6]

Infant Levels. Six exclusively and 7 partially breastfed infants whose mothers were receiving ocrelizumab for multiple sclerosis had undetectable serum levels of the drug 30 days after the maternal drug infusion.[6,7]

### Effects in Breastfed Infants

A retrospective cohort study from the German Multiple Sclerosis and Pregnancy Registry database identified 2 mothers who received ocrelizumab during breastfeeding. In one, the dose was 300 mg on day 20 postpartum and she nursed for 2.7 months after the dose. The second received 600 mg on day 194 postpartum and she nursed for 2.1 months after the dose. Blood counts were normal at well-baby visits at 59 and 39 days, respectively, after the dose and no abnormal infections had occurred. Another woman received rituximab 250 mg on day 55 postpartum and ocrelizumab 300 mg on day 333 postpartum. She breastfed for 22.9 months after the rituximab dose. Her infant had normal blood counts at 45 and 213 days after the rituximab dose, but had conjunctivitis and otitis media during this time.[8] Ocrelizumab exposure in breastmilk only had no effect on the B-cell count of one infant.[9]

A retrospective study identified 4 patients with multiple sclerosis who received ocrelizumab 600 mg while breastfeeding (extent not stated). No adverse effects were reported in the infants.[10]

A multicenter study of women who were receiving either ocrelizumab (n = 30) or rituximab (n = 15) for multiple sclerosis or neuromyelitis optica spectrum disorder followed their infants. Forty-three women breastfed their infants (n = 27 exclusively, n = 16 partially) for a median of 6.4 months (range 0.3 to 11.7). In the first 12 months of life, all infants grew and developed normally compared to WHO standards and a group of infants who were not breastfed. Beyond minor infections common to infancy, no unexpectedly severe or frequent infections arose. Four infants between the ages of 2.1 and 6.2 months who were breastfed after maternal ocrelizumab or rituximab had IgG and CD19 levels within the normal range.[5]

Thirteen infants whose mothers were receiving ocrelizumab for multiple sclerosis were followed beginning at a median of 2 months of age. Eleven infants had one or more 1 adverse event, but they were typical for the infant age, and none were serious. All infants had normal B-cell counts within the normal range for age.[6,11] A follow-up found that the infants’ B-cell levels remained normal with normal response to childhood vaccines at 1 year of age in 11 infants who were followed.[7,12]

An examination of data in the Roche global pharmacovigilance database covering November 5, 2008, to July 12, 2023, found breastfeeding exposure (defined as at least one maternal infusion while breastfeeding) for 122 infants. Of these infants, 7 breastfed infants had B-cell measurements, and none were abnormal. Five breastfed infants received live or live-attenuated vaccines with no reports of breakthrough infections following administration of common childhood vaccines and 9 (7.4%) infants had typical childhood infections reported compared to 12.2% of infants with no breastfeeding exposure to the drug. Six other breastfed infants had no reported infections and no data were reported for 107 infants.[13] It is possible that some of these infants were reported separately above.

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 6 unspecified serious adverse reactions reported in breastfed infants associated with ocrelizumab. Further details of the cases were not reported, so the causality cannot be verified.[14]

A prospective single-center cohort study of infants, born in 2013 to 2022 were followed up at 6 to 36 months postpartum via telephone interviews. One hundred eighty-three infants who were breastfed during maternal monoclonal antibody therapy for multiple sclerosis or neuromyelitis optica spectrum disorder were matched to infants of disease-modifying therapy-naïve mothers. No differences were found in developmental delay, systemic antibiotic use, severe infections, or hospitalizations. Of the 183 infants, 34 were exposed to natalizumab.[15]

A retrospective chart review found 8 term breastfed infants of multiple sclerosis patients who received ocrelizumab while breastfeeding, either exclusively, partially, or unknown. Ocrelizumab was reinitiated between 4 and 61.4 (median 10.4) weeks postpartum. Infants had their blood drawn at an average of 9.4 weeks after maternal drug initiation. Seven infants had CD19 counts that were within the normal range for age. One infant had a CD19 percentage of 8.2 that was below the normal laboratory range of 10.2 to 18.5%. This infant was delivered at 39 weeks of gestation with maternal reinitiation of ocrelizumab 600 mg at 4 weeks postpartum and infant blood draw 11 weeks postpartum. However, the distribution of B-cell subpopulations was considered to be normal for age. There was no increase in the number of infections noted in this infant.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon beta, Methylprednisolone, Natalizumab, Ofatumumab, Peginterferon beta

### References

1 Shipley J, Beharry J, Yeh W, . Consensus recommendations on multiple sclerosis management in Australia and New Zealand: Part 2. Med J Aust 2025;222:365-71.39923190
2 Jacob A, Shatila AO, Inshasi J, . Disease modifying treatment guidelines for multiple sclerosis in the United Arab Emirates. Mult Scler Relat Disord 2024;88:105703.38924933
3 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
4 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
5 Anderson A, Rowles W, Poole S, . Anti-CD20 monoclonal antibody therapy in postpartum women with neurological conditions. Ann Clin Transl Neurol 2023;10:2053-64.37675826
6 Hellwig K, Oreja-Guevara C, Dobson R, . 175. B-cell levels in infants of lactating women with multiple sclerosis receiving ocrelizumab: SOPRANINO primary results. Mult Scler Relat Disord 2024;92:105951. doi:10.1016/j.msard.2024.106136
7 Oreja-Guevara C, Vukusic S, Bove R, . Placental and breastmilk transfer of ocrelizumab from women with multiple sclerosis to infants: MINORE and SOPRANINO. Eur J Neurol 2025;32 (Suppl 1):EPR-056. doi:10.1111/ene.70191
8 Ciplea AI, Langer-Gould A, de Vries, A, . Monoclonal antibody treatment during pregnancy and/or lactation in women with MS or neuromyelitis optica spectrum disorder. Neurol Neuroimmunol Neuroinflamm 2020;7:e723.32327455
9 Schwake C, Steinle J, Thiel S, . Neonatal B-cell levels and infant health in newborns potentially exposed to anti-CD20 monoclonal antibodies during pregnancy or lactation. Neurol Neuroimmunol Neuroinflamm 2024;11:e200264.38870458
10 Chey SY, Kermode AG. Pregnancy outcome following exposure to ocrelizumab in multiple sclerosis. Mult Scler J Exp Transl Clin 2022;8:20552173221085737.35284087
11 Bove R, Oreja-Guevara C, Hellwig K, . B-cell levels and breastmilk transfer in infants of lactating women with multiple sclerosis treated with ocrelizumab: Primary results of the prospective multicenter, open-label Phase IV study SOPRANINO. Mult Scler J 2024;30 (3S):38-40. doi:10.1177/13524585241269218
12 Bove R, Hellwig K, Dobson R, . Humoral responses and 1-year follow up of infants potentially exposed to ocrelizumab during pregnancy and breastfeeding: final analysis of the prospective, multicentre, open-label, Phase IV studies MINORE and SOPRANINO. Mult Scler J 2025;31 (3 Suppl):99-100. doi:10.1177/13524585251358339
13 Vukusic S, Bove R, Dobson R, . Pregnancy and infant outcomes in women with multiple sclerosis treated with ocrelizumab. Neurol Neuroimmunol Neuroinflamm 2025;12:e200349.39689270
14 Heerfordt IM, Gotfredsen DR, Horwitz H, . EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431-6.40190021
15 Witt L, Friedmann N, Haben S, . Safety of breastfeeding under monoclonal antibodies in the offspring of mothers with multiple sclerosis or neuromyelitis optica spectrum disorder. J Neurol Neurosurg Psychiatry 2026;97:522-31.41760394
16 Shah A, Alvarez E. Absence of significant hematologic abnormalities in breastfed infants of mothers with multiple sclerosis treated with anti-CD20 therapies. Mult Scler J Exp Transl Clin 2026;12:20552173261454808.42226810

## Substance Identification

### Substance Name

Ocrelizumab

### CAS Registry Number

637334-45-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Biological Response Modifiers

Immunologic Adjuvants

Antibodies, Monoclonal